# Hydrocortisone

CASRN: 50-23-7

## Drug Levels and Effects

### Summary of Use during Lactation

Hydrocortisone (cortisol) is a normal component of breastmilk, but it has not been studied in milk after exogenous administration in pharmacologic amounts. Although it is unlikely that dangerous amounts of hydrocortisone would reach the infant, a better studied corticosteroid might be preferred. Maternal use of hydrocortisone as an enema would not be expected to cause any adverse effects in breastfed infants. Local maternal injections, such as for tendinitis, would not be expected to cause any adverse effects in breastfed infants. Medium to large doses of corticosteroids given systemically or injected into joints or the breast have been reported to cause temporary reduction of lactation. See also Hydrocortisone, Topical.

Cortisol in breastmilk might have a role in intestinal maturation, the intestinal microbiome, growth, body composition or neurodevelopment, but adequate studies are lacking.[1] Concentrations follow a diurnal rhythm, with the highest concentrations in the morning at about 7:00 am and the lowest concentrations in the late afternoon and evening.[2,3] Cortisol concentration in milk increases with infant age and milk cortisol levels; it decreases with complementary feeding and infant illness.[4,5] Cortisol in milk may protect against later infant obesity, especially in girls;[6] however, in another study, milk glucocorticoid levels were positively associated with percent fat mass, adiposity and head circumference at 1 year of age.[7] Maternal stress can increase breastmilk cortisol levels, especially with preterm births.[8-11] Milk cortisol may mediate infant emotions and infant sleep, but not crying, is correlated with the levels of cortisone and cortisol in milk.[12,13] Some information indicates that maternal adverse childhood experiences may decrease cortisol concentration in their breastmilk.[14]

### Drug Levels

Numerous methods have been used to measure cortisol in milk. Some have measured only unconjugated cortisol, and others have hydrolyzed sulfate and glucuronide conjugates to measure total cortisol. Neonates are unable to deconjugate these moieties, so the age of the infant affects the relevance of findings.[15]

Maternal Levels. Cortisol was measured in the colostrum and milk of 11 women monthly for up to 12 months postpartum. Levels in late pregnancy averaged 24.5 mcg/L and fell over the first 10 days postpartum to an average of 1.8 mcg/L. Milk cortisol levels between months 2 and 12 averaged 7.2 mcg/L, but varied with time and among individuals (range 0.2 to 32 mcg/L).[16]

Free cortisol was measured in 13 women on days 1, 2, and 3 postpartum (7 spontaneous births) or days 3, 4, and 5 postpartum (6 elective cesarean sections). Milk levels were measured before and after nursing, but the values were not statistically different. In the women with spontaneous deliveries, before and after milk levels averaged 17.2 mcg/L on day 1, 16.8 mcg/L on day 2, and 7.4 mcg/L on day 3 postpartum. In the women with cesarean deliveries, before and after milk levels averaged 26.5 mcg/L on day 3, 15.1 mcg/L on day 4, and 14.1 mcg/L on day 6 postpartum.[17]

Thirteen full-term mothers donated milk between 8 and 28 weeks postpartum. Unconjugated cortisol concentrations ranged from 1.45 to 8.34 mcg/L.[15]

A study compared 10 mothers who delivered preterm (<32 week) infants to 10 who delivered at 37 weeks or greater. Breastmilk cortisol concentrations were 50% lower in mothers of preterm infants in the first week postpartum, although the difference was not statistically significant.[3]

A study of 23 mothers found that the average cortisol concentration in breastmilk was 1.6 mcg/L over 24 hours. Concentrations were highest in the morning between 4:00 am and 10:00 am and lowest in the evening between 4:00 pm to 10:00 pm.[2]

Cortisol was measured in the breastmilk of 22 women who delivered preterm infants between 28 and 32 weeks of gestation. The average cortisol concentration in breastmilk was 4.48 mcg/L with considerable variation. Mothers who gave birth before 30 weeks of gestation had an average cortisol concentration of 1.61 mcg/L and those who delivered after 30 weeks had an average concentration of 2.16 mcg/L.[18]

Three hundred fifty-four milk samples were collected by 170 mothers of preterm infants in the morning at about 5 and 10 days and at 4 months corrected age. The median concentration of cortisol in preterm milk was 0.5 mcg/L (range 0.03 to 3.7 mcg/L) and of cortisone was 4.3 mcg/L (range 0.3 to 15.5 mcg/L). Cortisone concentrations were greater than cortisol at all time points. The cortisol concentration was higher in mature milk than in samples collected on days 5 and 10: day 5: 0.6 mcg/L; day 10: 0.5 mcg/L; 4 months 1.2 mcg/L. In contrast, cortisone concentrations did not change significantly over time: day 5, 5.2 mcg/L; day 10, 5.0 mcg/L; 4 months, 4.5 mcg/L. Mothers who received a complete course of antenatal corticosteroids had lower concentrations of cortisol (mean difference –0.3 mcg/L) and cortisone (mean difference –1.8 mcg/L) than mothers who did not.[19]

Thirty-eight healthy nursing mothers provided 24-hours milk samples during the first, third and sixth month of lactation. Cortisol concentrations averaged 11.2, 11.2, and 12 mcg/L, respectively. No associations were detected related to maternal or infant characteristics that were measured such as maternal psychological status and infant psychomotor development.[20]

Forty-eight women from upstate New York donated milk samples for cortisol analysis. Milk cortisol levels ranged from 0.98 to 10.07 mcg/L. Milk cortisol increased by 7.1% with each month of child age. Introduction of complementary foods was associated with a 41% lower milk cortisol and current symptoms of child illness were associated with 33% lower milk cortisol.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

None have been reported with any systemic corticosteroid.

### Effects on Lactation and Breastmilk

Published information on the effects of hydrocortisone on serum prolactin or on lactation in nursing mothers was not found as of the revision date. Medium to large doses of corticosteroids given systemically or injected into joints or the breast have been reported to cause temporary reduction of lactation.[21-25]

A study of 46 women who delivered an infant before 34 weeks of gestation found that a course of another corticosteroid (betamethasone, 2 intramuscular injections of 11.4 mg of betamethasone 24 hours apart) given between 3 and 9 days before delivery resulted in delayed lactogenesis II and lower average milk volumes during the 10 days after delivery. Milk volume was not affected if the infant was delivered less than 3 days or more than 10 days after the mother received the corticosteroid.[26] An equivalent dosage regimen of hydrocortisone might have the same effect.

A study of 87 pregnant women found that betamethasone given as above during pregnancy caused a premature stimulation of lactose secretion during pregnancy. Although the increase was statistically significant, the clinical importance appears to be minimal.[27] An equivalent dosage regimen of hydrocortisone might have the same effect.

### Alternate Drugs to Consider

(Systemic) Methylprednisolone, Prednisolone, Prednisone

### References

1 Hollanders JJ, Heijboer AC, van der Voorn B, et al. Nutritional programming by glucocorticoids in breast milk: Targets, mechanisms and possible implications. Best Pract Res Clin Endocrinol Metab 2017;31:397–408.29221568
2 Pundir S, Wall CR, Mitchell CJ, et al. Variation of human milk glucocorticoids over 24 hour period. J Mammary Gland Biol Neoplasia 2017;22:85–92.28144768
3 van der Voorn B, de Waard M, van Goudoever JB, et al. Breast-milk cortisol and cortisone concentrations follow the diurnal rhythm of maternal hypothalamus-pituitary-adrenal axis activity. J Nutr 2016;146:2174–9.27629575
4 Anyim R, Li S, Armstrong D, et al. Predictors of milk cortisol in North American women. Am J Hum Biol 2024;36:e23985.37712627
5 Kruger AL, Malpeli A, Sala M, et al. Human milk cortisol is inversely associated with infant BMI and mediates the association between maternal plasma and infant salivary cortisol concentrations. Int J Obes (Lond) 2025;49:1632–41.40450153
6 Hahn-Holbrook J, Le TB, Chung A, et al. Cortisol in human milk predicts child BMI. Obesity (Silver Spring) 2016;24:2471–4.27891832
7 Pundir S, Gridneva Z, Pillai A, et al. Human milk glucocorticoid levels are associated with infant adiposity and head circumference over the first year of life. Front Nutr 2020;7:166.33015131
8 Aparicio M, Browne PD, Hechler C, et al. Human milk cortisol and immune factors over the first three postnatal months: Relations to maternal psychosocial distress. PLoS One 2020;15:e0233554.32437424
9 Tekgündüz SE, Lazoğlu M, Nailoğlu M, et al. The relationship of preterm, term, and post-term births to maternal stress and human milk cortisol levels. Breastfeed Med 2023;18:462–8.37335326
10 Matyas M, Apanasewicz A, Krzystek-Korpacka M, et al. The association between maternal stress and human milk concentrations of cortisol and prolactin. Sci Rep 2024;14:28115.39548101
11 Lustermans H, Beijers R, de Weerth C. Investigating the impact of maternal stress on milk glucocorticoids: A multimethod approach. Psychophysiology 2025;62:e70150.40955757
12 Feizabad M, Pourhabibi-Zarandi F, Barati-Boldaji R, et al. Association of maternal psychological distress and milk cortisol with infant temperament and growth. Sci Rep 2025;15:12885.40234502
13 Bruinhof N, Beijers R, de Weerth C. Moment-to-moment bidirectional associations between human milk glucocorticoids and infant behavior. Psychoneuroendocrinology 2026;187:107790.41722487
14 Vacaru SV, Brett BE, Eckermann H, et al. Determinants of maternal breast milk cortisol increase: Examining dispositional and situational factors. Psychoneuroendocrinology 2023;158:106385.37757597
15 van der Voorn B, Martens F, Peppelman NS, et al. Determination of cortisol and cortisone in human mother's milk. Clin Chim Acta 2015;444:154–5.25687161
16 Kulski JK, Hartmann PE. Changes in the concentration of cortisol in milk during different stages of human lactation. Aust J Exp Biol Med Sci 1981;59 (Pt 6):769–78.7340774
17 Patacchioli FR, Cigliana G, Cilumbriello A, et al. Maternal plasma and milk free cortisol during the first 3 days of breast-feeding following spontaneous delivery or elective cesarean section. Gynecol Obstet Invest 1992;34:159–63.1427417
18 Pundir S, Mitchell CJ, Thorstensen EB, et al. Impact of preterm birth on glucocorticoid variability in human milk. J Hum Lact 2018;34:130–6.28903014
19 Muelbert M, Alexander T, Vickers MH, et al. Glucocorticoids in preterm human milk. Front Nutr 2022;9:965654.36238462
20 Zielinska-Pukos MA, Bryś J, Kucharz N, et al. Factors influencing cortisol concentrations in breastmilk and its associations with breastmilk composition and infant development in the first six months of lactation. Int J Environ Res Public Health 2022;19:14809.36429527
21 McGuire E. Sudden loss of milk supply following high-dose triamcinolone (Kenacort) injection. Breastfeed Rev 2012;20:32–4.22724311
22 Babwah TJ, Nunes P, Maharaj RG. An unexpected temporary suppression of lactation after a local corticosteroid injection for tenosynovitis. Eur J Gen Pract 2013;19:248–50.24261425
23 Smuin DM, Seidenberg PH, Sirlin EA, et al. Rare adverse events associated with corticosteroid injections: A case series and literature review. Curr Sports Med Rep 2016;15:171–6.27172081
24 Das N, Dave S, Dangaich R, et al. Lactation failure following therapeutic steroid treatment in a mother with postpartum depression and spinal-dural arteriovenous fistula: Case report and literature review. Int J Gynaecol Obstet 2024;165:389–91.38093554
25 Rosen-Carole C, Datta P, Palmiter K, et al. Transfer of injected triamcinolone into human milk of a lactating patient suffering from idiopathic granulomatous mastitis. Breastfeed Med 2023;18:74–7.36638194
26 Henderson JJ, Hartmann PE, Newnham JP, et al. Effect of preterm birth and antenatal corticosteroid treatment on lactogenesis II in women. Pediatrics 2008;121:e92–100.18166549
27 Henderson JJ, Newnham JP, Simmer K, et al. Effects of antenatal corticosteroids on urinary markers of the initiation of lactation in pregnant women. Breastfeed Med 2009;4:201–6.19772378

## Substance Identification

### Substance Name

Hydrocortisone

### CAS Registry Number

50-23-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Corticosteroids, Systemic

Glucocorticoids

Anti-Inflammatory Agents